# Ketotifen

CASRN: 34580-13-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because absorption from the eye is limited, ketotifen would not be expected to cause any adverse effects in breastfed infants after maternal use of ketotifen eye drops. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Cromolyn

## Substance Identification

### Substance Name

Ketotifen

### CAS Registry Number

34580-13-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Allergic Agents

Antihistamines

Antipruritics